# Calcitriol

CASRN: 32222-06-3

## Drug Levels and Effects

### Summary of Use during Lactation

Calcitriol is the normal physiologically active form of vitamin D, 1,25-dihydroxyvitamin D. Several women with hypocalcemia have successfully breastfed during breastfeeding, with sometimes fluctuating serum calcium levels. Limited data indicate that its use in nursing mothers in appropriately adjusted doses does not affect the breastfed infant. If the mother requires calcitriol, it is not a reason to discontinue breastfeeding. Calcitriol and calcium dosage requirements are usually reduced during lactation in women with hypoparathyroidism and failure to reduce doses can lead to hypercalcemia.[1-14]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with hypoparathyroidism breastfed her infant from week 1 to week 32 postpartum while taking calcitriol. The dose was initially 0.5 mcg daily, but was decreased to 0.25 mcg daily after 8 weeks. The infant thrived during breastfeeding and had normal serum calcium levels at 1 and 3 weeks and 3 months of age.[3]

A woman breastfed infants after two pregnancies while taking calcitriol in doses of 0.75 and 1 mcg daily. There were no reports of adverse reactions.[15]

A woman breastfed her newborn infant for 9 days while taking calcitriol 0.5 mcg three times daily. Calcitriol was stopped at that time because of hypercalcemia, but restarted at 40 days postpartum in low doses that were gradually increased until the prepregnancy dosage of 1.5 mcg daily was reached just before weaning at 12.5 months postpartum.[5]

A woman with discoid lupus was taking calcitriol 0.25 mcg every 2 days and several other medications concurrently. Her infant was breastfed for 12 months and followed up at 15 months of age. No adverse effects were reported during breastfeeding and the infant was growing and developing normally at 15 months of age.[16]

A nursing mother with autosomal dominant hypoparathyroidism type 1 was treated with teriparatide for 8 months postpartum then calcitriol 0.5 mcg twice daily was substituted. She breastfed her infant exclusively for 6 months then with supplementation to 1 year. Her infant had no change in serum calcium when maternal calcitriol was begun. The mother began weaning at 11 months and at 1 year of age weaning was complete. Growth and development were normal at 1.5 years of age. [11]

A mother had a total parathyroidectomy after noticing neck swelling during pregnancy. After the surgery she experienced symptoms of hypocalcemia. She was started on elemental calcium 4 grams daily and calcitriol 0.5 mcg twice a day, which resolved her symptoms. She began breastfeeding and one week after discharge, she had a serum calcium of 12.4 mg/dL. Calcium supplementation was stopped and her serum calcium normalized.[14]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hatswell BL, Allan CA, Teng J, et al. Management of hypoparathyroidism in pregnancy and lactation - A report of 10 cases. Bone Rep 2015;3:15–9.28377963
2 Caplan RH, Beguin EA. Hypercalcemia in a calcitriol-treated hypoparathyroid woman during lactation. Obstet Gynecol 1990;76 (3 Pt 2):485–9.2381632
3 Caplan RH, Wickus GG. Reduced calcitriol requirements for treating hypoparathyroidism during lactation. A case report. J Reprod Med 1993;38:914–8.8277494
4 Cathébras P, Cartry O, Sassolas G, et al. Hypercalcemia induced by lactation in 2 patients with treated hypoparathyroidism. Rev Med Interne 1996;17:675–6.8881196
5 Cundy T, Haining SA, Guilland-Cumming DF, et al. Remission of hypoparathyroidism during lactation: evidence for a physiological role for prolactin in the regulation of vitamin D metabolism. Clin Endocrinol (Oxf) 1987;26:667–74.3665123
6 Mather KJ, Chik CL, Corenblum B. Maintenance of serum calcium by parathyroid hormone-related peptide during lactation in a hypoparathyroid patient. J Clin Endocrinol Metab 1999;84:424–7.10022395
7 Rude RK, Haussler MR, Singer FR. Postpartum resolution of hypocalcemia in a lactating hypoparathyroid patient. Endocrinol Jpn 1984;31:227–33.6548698
8 Sweeney LL, Malabanan AO, Rosen H. Decreased calcitriol requirements during pregnancy and lactation, with a window of increased requirements immediately postpartum. Endocr Pract 2010;16:459–62.20061285
9 Krysiak R, Kobielusz-Gembala I, Okopien B. Hypoparathyroidism in pregnancy. Gynecol Endocrinol 2011;27:529–32.21463229
10 Hartogsohn EAR, Khan AA, Underbjerg L, et al. Changes in treatment needs of hypoparathyroidism during pregnancy and lactation: a case series. Clin Endocrinol (Oxf) 2020 32350890
11 Shulman D. Subcutaneous infusion of rhPTH(1-34) during pregnancy and nursing in a woman with autosomal dominant hypoparathyroidism 1. J Endocr Soc 2022;6:bvac031.35350394
12 Ali DS, Dandurand K, Khan AA. Hypoparathyroidism in pregnancy and lactation: Current approach to diagnosis and management. J Clin Med 2021;10:1378.33805460
13 Wang JJ, Wang O, Wang YB, et al. Changes in serum calcium and treatment of hypoparathyroidism during pregnancy and lactation: A single-center case series. J Clin Endocrinol Metab 2021;106:e5054–e63.34279662
14 Davis B. Iatrogenic hypercalcemia during lactation in a patient with postsurgical hypoparathyroidism. 2025;31:S28. doi:10.1016/j.eprac.2025.05.084
15 Callies F, Arlt W, Scholz HJ, et al. Management of hypoparathyroidism during pregnancy--report of twelve cases. Eur J Endocrinol 1998;139:284–9.9758437
16 Moretti ME, Verjee Z, Ito S, et al. Breast-feeding during maternal use of azathioprine. Ann Pharmacother 2006;40:2269–72.17132809

## Substance Identification

### Substance Name

Calcitriol

### CAS Registry Number

32222-06-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bone Density Conservation Agents

Vitamins

Vitamin D